# Olanzapine

CASRN: 132539-06-1

## Drug Levels and Effects

### Summary of Use during Lactation

Maternal doses of olanzapine up to 20 mg daily produce low levels in milk and undetectable levels in the serum of breastfed infants. In most cases, short-term side effects have not been reported, but sedation, irritability, poor feeding, tremors and abnormal muscle movements have occurred. Limited long-term follow-up of infants exposed to olanzapine indicates that infants generally developed normally. A safety scoring system finds olanzapine to be acceptable during breastfeeding.[1] Systematic reviews of second-generation antipsychotics concluded that olanzapine seems to be a first-line agent during breastfeeding.[2-4] Monitor the infant for drowsiness, irritability, poor feeding, tremors and abnormal muscle movements in the short-term, and developmental milestones over time, especially if other antipsychotics are used concurrently.

No information is available on the use of samidorphan, which is a component of Lybalvi, during breastfeeding. If a mother requires olanzapine and samidorphan it is not a reason to discontinue breastfeeding. Because samidorphan is a partial opiate agonist, the combination might cause increased drowsiness or respiratory depression than olanzapine alone.

### Drug Levels

Maternal Levels. A nursing mother started on olanzapine 20 mg daily on day 9 postpartum. Numerous milk olanzapine levels collected over the subsequent 8 days ranged from 7.6 to 27.5 mcg/L. The authors calculated that an exclusively breastfed infant would receive 0.011 mg/kg daily or about 4% of the maternal weight-adjusted dosage.[5]

Nine paired serum and milk levels were obtained from 5 mothers who were taking olanzapine. In 2 women taking 10 mg daily, one had a milk level of 21 mcg/L 11 hours after the dose and the other had a milk level of 16 mcg/L 23 hours after the dose. In 3 women taking 2.5 mg daily, milk levels ranged from <1 to 8 mcg/L 11 to 12 hours after the dose, 4 mcg/L at 16 hours after the dose and 2 to 7 mcg/L at 22 to 23 hours after the dose. Using these data, an exclusively breastfed infant would consume an average of 1.6% of the maternal weight-adjusted dosage (range 0 to 2.66%).[6]

Seven mother-infant pairs were studied during maternal olanzapine use. The mean dose was 7.5 mg daily (range 5 to 20 mg daily) and serum levels were at steady state. A median peak serum level of 16 mcg/L occurred 5.2 hours (range 0.7 to 13.2 hours) after the dose. The median infant dosage was 1.12% (range 0.22 to 1.19%) of the maternal weight-adjusted dosage in 6 of the mothers and 1.13% in the seventh.[7]

A woman was taking olanzapine 5 mg orally 3 times daily, amounting to 270 mcg/kg daily. After 11 days on olanzapine, a milk sample was taken just before nursing (time after dose not reported). The concentration of olanzapine was 12 ng per gram of breastmilk. The authors estimated that was 0.3% of the maternal weight-adjusted dosage.[8]

A woman was started on oral olanzapine 5 mg in the morning and 10 mg in the evening daily 3 months postpartum. Two weeks later, the milk concentration (time after dose not stated) was 5 mcg/L. Over a period of 5 months, milk olanzapine concentrations decreased somewhat with time and a reduction in dosage to a concentration of 3 mcg/L with a dosage of 10 mg daily.[9]

One woman was taking olanzapine 15 mg daily at 11 pm. She avoided breastfeeding from 11 pm to 7 am each day. Breastmilk samples were collected at 4 am, 8 am and 11 pm daily for 26 days. The average olanzapine concentrations in her breastmilk were 15.8 mcg/L, at 4 am, 15.1 mcg/L at 8 am, and 7.8 mcg/L at 11 pm. The authors estimated that her infant would receive a maximum of 0.78 mg/kg daily and a median dosage of 0.21 mg/kg daily, which would translate to 0.47% and 0.13% of the weight-adjusted maternal dosage, respectively.[10]

Three women were taking olanzapine while breastfeeding. Dosages and corresponding milk olanzapine levels were as follows: 0.18 mg/kg daily with a level of 30 mcg/L on day 11 postpartum; 0.26 mg/kg daily with a milk level of 35 mcg/L on day 10 postpartum; and 0.26 mg/kg daily with 8 milk levels were taken at 2 weeks postpartum. Levels ranged from 11 mcg/L at 23 hours after a dose to 21 mcg/L at 9 hours after the following dose.[11]

A woman with bipolar disorder who delivered twins and was taking sodium valproate was started on olanzapine 15 mg and quetiapine 200 mg at 11 pm daily after 20 days postpartum. She withheld breastfeeding during the night and discarded milk pumped at 7 am. She then breastfed her infants until 11 pm. After 7 days of therapy, milk samples were obtained at 4 am, 8 am and 11 pm for 27 of the next 45 days. The median average daily olanzapine milk concentration was 10.2 mcg/L. Median milk concentrations were 12.7 mcg/L at 4 am, 10 mg/L at 8 am and 7.6 mg/L at 11 pm. The authors calculated that if the infants had been fully breastfed, they would have received a daily dosage of 1.29 mcg/kg or 0.74% of the maternal weight-adjusted dosage. By withholding nursing during the night, the infants' quetiapine dosage was reduced by 36% compared to the dose they would have received if they had been breastfed around the clock.[12]

A woman with psychosis began treatment with long-acting olanzapine injection during pregnancy. The drug was continued postpartum at a dose of 210 mg every 2 weeks. Four milk samples were obtained at 6 weeks and 7 months postpartum. Milk olanzapine levels ranged from 14.4 to 23.7 mcg/L (46 to 76 nmol/L), which correspond to 0.7 to 1% of the maternal weight-adjusted dosage.[13]

Infant Levels. At birth, the infant of one mother who was taking olanzapine 10 mg daily orally had an olanzapine serum level of about one-third that of the mother. The infant was breastfed (extent not stated) and had undetectable serum levels (<2 mcg/L) at 2 and 6 weeks of age.[14]

In one 4-month-old infant, olanzapine was undetectable (<1 mcg/L) in serum 15 hours after the mother's dose (dose unstated).[6]

Olanzapine was undetectable (<0.1 to 0.5 mcg/L) in the serum of 5 breastfed infants with an average age 2.4 months (range 0.1 to 4.3 months) whose mothers were taking a mean dose of 7.5 mg daily (range 2.5 to 20 mg daily).[7]

A 5-month-old infant was breastfed (extent not stated) by a mother who had been taking olanzapine 5 mg 3 times daily for 11 days. After an overnight fast, the infant's serum olanzapine concentration was <5 mcg/L.[8]

The mother of a 3 month-old breastfed (extent not stated) infant was started on olanzapine 5 mg in the morning and 10 mg in the evening daily by mouth. Two weeks later, the infant's olanzapine serum concentration (time stated) was 11 mcg/L. At 5 and 6 months of age, the serum concentration was 0 and 0.8 mcg/L, respectively. At 7 months of age, the serum concentration was 1.3 mcg/L with a maternal dose of 10 mg daily. At 8 months of age, the serum concentration was 0.02 mcg/L with a maternal dose of 5 mg daily. At 9 months of age, the serum concentration was 0.8 mcg/L with a maternal dose of 10 mg daily. Whether the variability in infant concentrations was caused by variable sampling times or by changes in maternal dosage, infant metabolism, or extent of breastfeeding cannot be determined from the report.[9]

In three case reports, mothers taking dosages of olanzapine of 0.17, 0.18 and 0.26 mg/kg daily breastfed their newborn infants (extent: one full, one partial and the other not clearly stated). All infants had undetectable (<5 mcg/L) olanzapine plasma levels after 4 days to 2 weeks of nursing.[11]

A woman with psychosis began treatment with long-acting olanzapine injection during pregnancy. The drug was continued postpartum at a dose of 210 mg every 2 weeks. Four plasma samples were obtained at 6 weeks and 7 months postpartum. Serum concentrations in breastfed (extent not stated) were less than the limit of detection in all samples (<2.3 mcg/L [<7.5 nmol/L]).[13]

### Effects in Breastfed Infants

The manufacturer compiled reports of adverse effects reported in breastfed infants whose mothers were taking olanzapine.[15] Reports were compiled from spontaneous reports from physicians and mothers, clinical trials and published papers. Details of the exposures were not provided. Some of the infants reported appear to be the same as those reported in references [6-9] below. Overall, 102 breastfed infants were identified whose mothers were taking olanzapine. Of these, 62 reported dosages that averaged 7.4 mg daily by mouth taken during pregnancy. The duration of exposure to olanzapine was reported in 30 nursing mothers with a median of 30 days and mean of 74 days. Of the infants exposed to olanzapine via breastmilk, 15.6% reportedly experienced adverse effects, primarily somnolence, irritability, tremor and insomnia.[15] It appears that at least some of the adverse effects may have been a result of prenatal exposure to olanzapine.

One infant was breastfed for 2 months during maternal intake of olanzapine 10 mg daily. No abnormalities were found in growth and development during 11 months of follow-up.[14]

Five infants aged 3 weeks to 6 months were breastfed during maternal olanzapine 2.5 to 10 mg daily. No adverse health or developmental effects were noted during the observation period of 5 days to 8 weeks.[6]

One infant was breastfed from birth during maternal use of olanzapine 5 mg daily orally. The infant was healthy at 6 months of age.[16]

Six breastfed infants with an average age of 2.4 months (range 0.1 to 4.3 months) whose mothers were taking olanzapine 2.5 to 20 mg daily had no adverse effects reported by their mothers or found on detailed medical testing. Development was deemed normal in 4 infants after extensive testing. A fifth had a somewhat decreased intellectual development on testing, but her mother had also taken clonazepam, droperidol, sertraline, thioridazine and valproic acid while breastfeeding. Four of the infants' body weight were maintained, one fell slightly, and one dropped from the 97th percentile at birth to the 50th percentile upon later measurement. One of the infants reportedly had drowsiness during maternal intake of 10 mg daily, but it was not evident 3 weeks after reducing the dose to 5 mg daily. The drowsiness was possibly related to olanzapine in milk.[7]

A 5-month-old infant was breastfed (extent not stated) by a mother who took olanzapine 5 mg 3 times daily for 13 days, then 5 mg twice daily. The infant was followed up after 2 months. The infant gained weight steadily and no jaundice or motor function impairment were noted.[8]

A case-control study compared mothers who took olanzapine 2.5 to 10 mg daily during breastfeeding to those who took the drug and did not breastfeed, and nursing mothers who took acetaminophen which is thought to be safe during breastfeeding. Mothers filled out a questionnaire regarding adverse infant outcomes at 1 to 2 years postpartum. The percentage of adverse outcomes in the breastfed infants who were exposed to olanzapine in breastmilk (n = 22) was greater (14%), than those in the nonbreastfed (n = 15; 7%) and breastfed infants without olanzapine exposure (n = 51; 8%), but these differences were not statistically significant. Long-term adverse outcomes seen included speech delay in 1 infant, motor development delay in 1 infant and failure to gain weight in 2 infants (one infant experienced 2 adverse outcomes).[17]

A woman took 10 mg of olanzapine (0.18 mg/kg) daily during pregnancy and postpartum She began breastfeeding at 7 days postpartum and continued to breastfeed for an unstated period. At 12 weeks of age, a pediatric examination was normal. Another woman who took olanzapine throughout pregnancy was taking olanzapine 0.17 mg/kg daily while she partially breastfed her infant. The total duration of breastfeeding was not stated, but the infant had developed normally at 20 months of age.[11]

A woman with bipolar disorder who delivered twins and was taking sodium valproate in a therapeutic dosage was started on olanzapine 15 mg and quetiapine 200 mg at 11 pm daily after 20 days postpartum. She withheld breastfeeding during the night and discarded milk pumped at 7 am. She then breastfed her infants until 11 pm. The mother continued feeding the infants on this schedule for 15 months. Monthly follow-up of the infants indicated normal growth and neither the pediatricians nor the parents noted any adverse effects in the infants.[12]

A woman with bipolar disorder was treated with olanzapine 10 mg and haloperidol 5 mg daily at the end of pregnancy and during breastfeeding (extent not stated). Follow-up of the breastfed infant for 11 months found no adverse effects and normal development of the infant.[18]

A woman with bipolar disorder was treated with olanzapine 10 mg and haloperidol 5 mg daily at the end of pregnancy and during breastfeeding (extent not stated). Follow-up of the breastfed infant for 11 months found no adverse effects and normal development of the infant.[16] The same author reported 5 infants who were breastfed (extent not stated) during postpartum maternal treatment for bipolar disorder. Olanzapine dosages were 5 or 10 mg daily. None of the mothers reported any adverse effects in their infants.[19]

A prospective cohort study of infants breastfed by mothers in an inpatient mother-baby psychiatric unit in India followed 8 infants who were exposed to olanzapine in breastmilk; most received partial supplementation. Two infants developed sedation, although the mother of one was also taking chlorpromazine. One infant whose mother was taking olanzapine 20 mg, ranitidine 300 mg, and cough syrup developed constipation. Infants were followed for 1 to 3 months after discharge. Two infants had delayed weight development, although one had also been exposed to phenytoin in utero. One infant who weighed 2 kg at birth had delay in height and a third infant had motor and mental delay.[20]

Patients enlisted in the National Pregnancy Registry for Atypical Antipsychotics who were taking a second-generation antipsychotic drug while breastfeeding (n = 576) were compared to control breastfeeding patients who were not treated with a second-generation antipsychotic (n = 818). Of the patients who were taking a second-generation antipsychotic drug, 60.4% were on more than one psychotropic. A review of the pediatric medical records, no adverse effects were noted among infants exposed or not exposed to second-generation antipsychotic monotherapy or to polytherapy.[21] The number of women taking olanzapine was not reported.

### Effects on Lactation and Breastmilk

Unlike the phenothiazines, olanzapine has a minimal effect on serum prolactin levels.[22-26] However, olanzapine-induced hyperprolactinemia and galactorrhea have been reported.[27] One patient was also taking venlafaxine and interferon beta-1b which can increase serum prolactin; however, galactorrhea began only after olanzapine was started.[28]

In 2 studies, some patients who were taking a conventional antipsychotic agent or risperidone had their medication changed to olanzapine. Previously elevated prolactin levels normalized, and galactorrhea diminished or stopped.[26,29]

Patients enlisted in the National Pregnancy Registry for Atypical Antipsychotics who were taking a second-generation antipsychotic drug while breastfeeding (n = 576) were compared to control breastfeeding patients who had primarily diagnoses of major depressive disorder and anxiety disorders, most often treated with SSRI or SNRI antidepressants, but not with a second-generation antipsychotic (n = 818). Among women on a second-generation antipsychotic, 60.4% were on more than one psychotropic compared with 24.4% among women in the control group. Of the women on a second-generation antipsychotic, 59.3% reported “ever breastfeeding” compared to 88.2% of women in the control group. At 3 months postpartum, 23% of women on a second-generation antipsychotic were exclusively breastfeeding compared to 47% of women in the control group.[21] The number of women taking olanzapine was not reported.

A single-center, retrospective cohort study over a 7-year period from January 2018 to January 2025 identified a total of 33 children aged 2 to 18 years who had drug-induced hyperprolactinemia. Risperidone was responsible for 27 of the cases. In all cases, prolactin levels normalized within a median time frame of 4 to 6 weeks after discontinuation of the drug or switching to an alternative medication.[30]

A review of the FDA’s FAERS database analyzed 6,195 reports of drug-induced galactorrhea in all patient populations. Olanzapine had the fifth-highest report count (134) of all drugs reported.[31]

### Alternate Drugs to Consider

(Antipsychotic) Haloperidol, Quetiapine, Risperidone; (Bipolar Disorder) Divalproex, Lithium, Quetiapine, Risperidone, Valproic Acid

### References

1 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118-e26 30601177
2 Uguz F. Second-generation antipsychotics during the lactation period: A comparative systematic review on infant safety. J Clin Psychopharmacol 2016;36:244-52 27028982
3 Pacchiarotti I, Leon-Caballero J, Murru A, et al. Mood stabilizers and antipsychotics during breastfeeding: Focus on bipolar disorder. Eur Neuropsychopharmacol 2016;26:1562-78 27568278
4 Larsen ER, Damkier P, Pedersen LH, et al. Use of psychotropic drugs during pregnancy and breast-feeding. Acta Psychiatr Scand Suppl 2015;445:1-28 26344706
5 Ambresin G, Berney P, Schulz P, et al. Olanzapine excretion into breast milk: A case report. J Clin Psychopharmacol 2004;24:93-5 14709955
6 Croke S, Buist A, Hackett LP, et al. Olanzapine excretion in human breast milk: Estimation of infant exposure. Int J Neuropsychopharmacol 2002;5:243-7 12366877
7 Gardiner SJ, Kristensen JH, Begg EJ, et al. Transfer of olanzapine into breast milk, calculation of infant drug dose, and effect on breast-fed infants. Am J Psychiatry 2003;160:1428-31 12900304
8 Lutz UC, Wiatr G, Orlikowsky T, et al. Olanzapine treatment during breast feeding: A case report. Ther Drug Monit 2008;30:399-401 18520614
9 Whitworth A, Stuppaeck C, Yazdi K, et al. Olanzapine and breast-feeding: Changes of plasma concentrations of olanzapine in a breast-fed infant over a period of 5 months. J Psychopharmacol 2010;24:121-3 18801835
10 Var L, Ince I, Topuzoglu A, et al. Management of postpartum manic episode without cessation of breastfeeding: A longitudinal follow up of drug excretion into breast milk. Eur Neuropsychopharmacol 2013;23 (Suppl 2):S382. https://www.sciencedirect.com/journal/european-neuropsychopharmacology/vol/23/suppl/S2
11 Stiegler A, Schaletzky R, Walter G, et al. Olanzapine treatment during pregnancy and breastfeeding: A chance for women with psychotic illness? Psychopharmacology (Berl) 2014;231:3067-9 24938920
12 Aydin B, Nayir T, Sahin S, et al. Olanzapine and quetiapine use during breastfeeding: Excretion into breast milk and safe breastfeeding strategy. J Clin Psychopharmacol 2015;35:206-8 25679127
13 Manouilenko I, Öhman I, Georgieva J. Long-acting olanzapine injection during pregnancy and breastfeeding: A case report. Arch Womens Ment Health 2018;21:587-9 29637404
14 Kirchheiner J, Berghofer A, Bolk-Weischedel D. Healthy outcome under olanzapine treatment in a pregnant woman. Pharmacopsychiatry 2000;33:78-80 10761825
15 Brunner E, Falk DM, Jones M, et al. Olanzapine in pregnancy and breastfeeding: A review of data from global safety surveillance. BMC Pharmacol Toxicol 2013;14:38 23902726
16 Friedman SH, Rosenthal MB. Treatment of perinatal delusional disorder: A case report. Int J Psychiatry Med 2003;33:391-4 15152788
17 Gilad O, Merlob P, Stahl B, et al. Outcome of infants exposed to olanzapine during breastfeeding. Breastfeed Med 2011;6:55-8 21034242
18 Uguz F. Breastfed infants exposed to combined antipsychotics: Two case reports. Am J Ther 2016;23:e1962-e4 26539905
19 Uguz F. Prophylactic use of olanzapine and quetiapine from pregnancy to the postpartum period in women with bipolar disorder: A case series. J Matern Fetal Neonatal Med 2017;30:2569-71 27809629
20 Sinha SK, Thomas Kishore M, Thippeswamy H, et al. Adverse effects and short-term developmental outcomes of infants exposed to atypical antipsychotics during breastfeeding. Indian J Psychiatry 2021;63:52-7 34083820
21 Viguera AC, Vanderkruik R, Gaccione P, et al. Breastfeeding practices among women taking second-generation antipsychotics: Findings from the National Pregnancy Registry for Atypical Antipsychotics. Arch Womens Ment Health 2022;25:511-6 34318375
22 Crawford AM, Beasley CM, Jr, Tollefson GD. The acute and long-term effect of olanzapine compared with placebo and haloperidol on serum prolactin concentrations. Schizophr Res 1997;26:41-54 9376336
23 Maguire GA. Prolactin elevation with antipsychotic medications: Mechanisms of action and clinical consequences. J Clin Psychiatry 2002;63 (Suppl 4):56-62 11913677
24 Bergemann N, Mundt C, Parzer P, et al. Plasma concentrations of estradiol in women suffering from schizophrenia treated with conventional versus atypical antipsychotics. Schizophr Res 2005;73:357-66 15653282
25 Weiden PJ, Daniel DG, Simpson G, et al. Improvement in indices of health status in outpatients with schizophrenia switched to ziprasidone. J Clin Psychopharmacol 2003;23:595-600 14624190
26 Kim KS, Pae CU, Chae JH, et al. Effects of olanzapine on prolactin levels of female patients with schizophrenia treated with risperidone. J Clin Psychiatry 2002;63:408-13 12019665
27 Glocker C, Grohmann R, Engel R, et al. Galactorrhea during antipsychotic treatment: Results from AMSP, a drug surveillance program, between 1993 and 2015. Eur Arch Psychiatry Clin Neurosci 2021;271:1425-35 33768297
28 Miller DE, Sebastian CS. Olanzapine-induced hyperprolactinemia and galactorrhea reversed with addition of bromocriptine: A case report. J Clin Psychiatry 2005;66:269-70 15705020
29 Kinon BJ, Ahl J, Liu-Seifert H, et al. Improvement in hyperprolactinemia and reproductive comorbidities in patients with schizophrenia switched from conventional antipsychotics or risperidone to olanzapine. Psychoneuroendocrinology 2006;31:577-88 16488084
30 Kilci F, Sarikaya E, Murat NÖ, et al. Hyperprolactinemia in children and adolescents: clinical characteristics and etiological spectrum. Eur J Pediatr 2025;184:366 40437161
31 Liu Y, Hu D, Lu Y, et al. Global large-scale real-world assessment of drug-associated galactorrhea based on FDA adverse drug reaction reports. Pak J Pharm Sci 2026;39:1-9 41482770

## Substance Identification

### Substance Name

Olanzapine

### CAS Registry Number

132539-06-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipsychotic Agents